# Miglitol

CASRN: 72432-03-2

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that miglitol is poorly excreted into breastmilk. Because miglitol is also poorly absorbed orally, it is unlikely to adversely affect the breastfed infant.

### Drug Levels

Maternal Levels. No published information was found as of the revision date. According to the manufacturer, 0.02% of a 100 mg oral dose or 0.2% of the weight-adjusted maternal dosage is excreted into breastmilk.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acarbose (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1/), Colesevelam (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM516/), Glipizide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM127/), Glyburide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM128/), Insulin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM147/), Metformin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM173/), Semaglutide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/), Tirzepatide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/)

## Substance Identification

### Substance Name

Miglitol

### CAS Registry Number

72432-03-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents